# Ceftobiprole

CASRN: 209467-52-7

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of ceftobiprole during breastfeeding. No serious adverse effects have been reported for other cephalosporin antibiotics during breastfeeding. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush have been reported with cephalosporins, but these effects have not been adequately evaluated. Ceftobiprole is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Ceftobiprole

### CAS Registry Number

209467-52-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Cephalosporins